# Chloral Hydrate

CASRN: 302-17-0

## Drug Levels and Effects

### Summary of Use during Lactation

Short-term or occasional use of chloral hydrate during breastfeeding is unlikely to adversely affect the breastfed infant, especially if the infant is older than 2 months. Because the active metabolite of chloral hydrate has a long half-life, other sedative-hypnotics are preferred for long-term use during breastfeeding, especially while nursing a neonate or preterm infant. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. In a study of 50 women who were given 1.3 grams of chloral hydrate rectally on day 3 postpartum, peak chloral hydrate milk levels of about 10 mg/L occurred within the first hour and fluctuated between 6 and 10 mg/L for 10 hours after the dose. Milk levels of the active metabolite, trichloroethanol, reached a peak of about 40 mg/L at 45 minutes after the dose and gradually decreased to about 12 mg/L over the next 23 hours.[1]

After 1.3 grams of dichloralphenazone daily dichloralphenazone (equivalent to about 1 gram of chloral hydrate), milk trichloroethanol levels were found to range from 1.3 to 3.2 mg/L in one woman.[2]

Infant Levels. After a 1.3 gram maternal dose of dichloralphenazone (equivalent to about 1 gram of chloral hydrate), trichloroethanol was detected in the breastfed infant's plasma 21 hours later.[2]

### Effects in Breastfed Infants

An old review article states that if an infant is breastfed within 45 minutes of a maternal dose of chloral hydrate while she is taking 1.5 grams twice daily, the infant will fall into a prolonged, restless sleep.[3]

A single maternal rectal dose of 1.3 grams chloral hydrate in 50 women was stated to not adversely affect their breastfed newborn infants.[1]

Minimal morning sedation occurred in a 5-month-old breastfed infant whose mother was taking 1.3 grams of dichloralphenazone (equivalent to about 1 gram of chloral hydrate) every evening plus chlorpromazine 100 mg 3 times daily. The infant's overall development was said to be normal at 3 months of age.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Bernstine JB, Meyer AE, Bernstine RL. Maternal blood and breast milk estimation following the administration of chloral hydrate during the puerperium. J Obstet Gynaecol Br Emp 1956;63:228-31.13320217
2 Lacey JH. Dichloralphenazone and breast milk. Br Med J 1971;4:684.5134581
3 Reed CB. A study of the conditions that require removal of the child from the breast. Surg Gynecol Obstet 1908;6:514-27.

## Substance Identification

### Substance Name

Chloral Hydrate

### CAS Registry Number

302-17-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives